# Atogepant

CASRN: 1374248-81-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of atogepant during breastfeeding. However, amounts in breastmilk are low and virtually absent from milk 16 hours after a dose. Atogepant would not be expected to cause any adverse effects in breastfed infants. If atogepant is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Twelve healthy lactating adult women 1 to 6 months postpartum were given a single 60 mg oral dose of atogepant in a multicenter study. Milk samples were collected prior to the dose and over the following intervals: 0 to 2, 2 to 4, 4 to 8, 8 to 12, 12 to 16, and 16 to 24 hours after the dose. The average peak milk level occurred at an average of 2 hours (range 1 to 3 hours) and averaged 75 mcg/L. A total of 9 mcg was excreted into milk over the collection period and the calculated relative infant dose averaged 0.19%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Topiramate, Valproic Acid; (Migraine Treatment) Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Boinpally RR, Smith JH, De Abreu Ferreira RL, . Pharmacokinetics of atogepant in healthy lactating female participants: Results from a phase 1 lactation study. Neurol Ther 2025;14:1461–73.40455369

## Substance Identification

### Substance Name

Atogepant

### CAS Registry Number

1374248-81-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Calcitonin Gene Related Peptide Receptor Antagonists

CGRP-R Inhibitors